# Berdazimer

CASRN: 1846565-00-1

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the use of berdazimer gel during breastfeeding. Because it is a very large molecule, it is unlikely to be absorbed from the skin or pass into breastmilk. It is acceptable to use during breastfeeding, but avoid application to the nipple area and ensure that the infant's skin does not come into direct contact with the areas of skin that have been treated.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

## Substance Identification

### Substance Name

Berdazimer

### CAS Registry Number

1846565-00-1

### Drug Class

Breast Feeding

Lactation

Milk, Human

Siloxanes